# Artemether and Lumefantrine

CASRN: 141204-94-6

## Drug Levels and Effects

### Summary of Use during Lactation

Artemether and lumefantrine have not been studied in nursing mothers. Estimates of its excretion into breastmilk indicate that amounts in milk are much lower than the dose approved for use in African countries in young infants <5 kg (5 mg artemether plus 60 mg lumefantrine daily). If a mother requires artemether and lumefantrine, it is not a reason to discontinue breastfeeding. Tablets can be crushed and administered in breastmilk to enhance absorption in small infants.[1]

### Drug Levels

Maternal Levels. The excretion of artemether and lumefantrine in breastmilk was estimated from average maximum serum concentrations after a standard 6-dose regimen of artemether 40 mg and lumefantrine 240 mg daily, assuming a M/P ratio of 1.04 for artemether and 1.3 for lumefantrine. The authors estimated that a fully breastfed infant would receive 0.03 mg daily of artemether or less than 0.4% of the recommended dose for a 5 kg infant, and 5 mg daily of lumefantrine or less than 10% of the recommended dose for a 5 kg infant.[2]

A physiologically based pharmacokinetic model of the active artemether metabolite, dihydroartemesin, estimated that it has an RID of 0.2%.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atovaquone and Proguanil, Chloroquine, Mefloquine,

### References

1 Adjei GO, Goka BQ, Binka F, et al. Artemether-lumefantrine: An oral antimalarial for uncomplicated malaria in children. Expert Rev Anti Infect Ther 2009;7:669–81.19681693
2 Jain JP, Ganesan S, Lefevre G, et al. Estimating of the amount of artemether and lumefantrine excreted through breast milk. Trop Med Int Health 2015;20 (Suppl. S1):184–5.25365928
3 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940

## Substance Identification

### Substance Name

Artemether and Lumefantrine

### CAS Registry Number

141204-94-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents